# Pramoxine

CASRN: 140-65-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of pramoxine during breastfeeding. Direct ingestion of pramoxine has resulted mostly of nausea and vomiting, with no serious toxicity;[1] however, it should be wiped off thoroughly prior to nursing if it is being applied to the breast or nipple area.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Spiller HA, Baker SD, Smith GW, et al. Evaluation of pramoxine ingestion as reported to poison centers. Ann Pharmacother 2006;40:996-7.16595565

## Substance Identification

### Substance Name

Pramoxine

### CAS Registry Number

637-58-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anesthetics, Local